# Varicella Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

The Centers for Disease Control and Prevention and the several health professional organizations state that vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to varicella vaccine. Breastfed infants have rarely developed varicella rashes after maternal vaccination, but transmission has also occurred in the absence of breastfeeding, so the role of breastfeeding in transmission to infants is not known.[1] Breastfed infants should be vaccinated according to the routine recommended schedules.[2,3]

### Drug Levels

Maternal Levels. Two postpartum women immunized with varicella vaccine provided preimmunization and serial postimmunization breastmilk samples (number not specified). One sample of colostrum contained detectable viral DNA and B-actin by polymerase chain reaction, but all other samples were negative for these species. No varicella gene sequences were found in any of the samples.[4]

One study of 12 women vaccinated with live, attenuated varicella vaccine found no evidence of varicella virus excretion into breastmilk.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Limited data indicate that breastfeeding can enhance the response of the infant to certain vaccine antigens.[2,6]

A 25-day-old otherwise healthy infant developed a rash that was found to be caused by the varicella vaccine strain. The baby’s mother received the varicella vaccine (Varivax, Merck & Co) on day 3 postpartum, when the infant was present in the room. Neither the mother nor any known contact had a rash prior to the infant’s rash. No other known contact had been vaccinated in the 90 days prior to the infant’s presentation at the clinic. The infant was primarily formula-fed, but received expressed breastmilk 4 times a day. The authors considered transmission via breastmilk, saliva or respiratory spread unlikely, but possible. The most likely exposure was thought to be via aerosolization at the time of vaccine administration.[7]

A 26-day-old infant presented with a rash that was determined to be caused by varicella vaccine. The infant’s mother had received the vaccine on the first day postpartum and developed erythematous, papular lesions on her scalp, hands, and abdomen on day 21 postpartum. She had breastfed her infant until day 21 when she switched the infant’s feeding to formula. The infant’s lesions developed on day 24 of life. The role of breastfeeding in the development of the infant’s lesions is unclear.[8]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Marin M, Leung J, Gershon AA. Transmission of vaccine-strain varicella-zoster virus: A systematic review. Pediatrics 2019;144:452–3.31471448
2 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
3 Jamieson DJ, Munoz FM, Rasmussen SA. Maternal immunization. Obstet Gynecol 2026;147:661–78.41712936
4 Dolbear GL, Moffat J, Falkner C, et al. A pilot study: Is attenuated varicella virus present in breast milk after postpartum immunization? Obstet Gynecol 2003;101 (4 Suppl):47s. https://journals.lww.com/greenjournal/toc/2003/04001#1229898841
5 Bohlke K, Galil K, Jackson LA, et al. Postpartum varicella vaccination: Is the vaccine virus excreted in breast milk? Obstet Gynecol 2003;102:970–7.14672472
6 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991–5.9380478
7 Kluthe M, Herrera A, Blanca H, et al. Neonatal vaccine-strain varicella-zoster virus infection 22 days after maternal postpartum vaccination. Pediatr Infect Dis J 2012;31:977–9.22572750
8 Saringkarisate K, Len KA, Melish ME, et al. Vaccine-strain varicella virus transmitted to a term infant following maternal postpartum vaccination. J Pediatric Infect Dis Soc 2022;11:452–3.35751631

## Substance Identification

### Substance Name

Varicella Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines